# Quazepam

CASRN: 36735-22-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the long-term use of quazepam during breastfeeding. Because the drug and metabolites could accumulate in the breastfed infant, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Quazepam has a half-life of about 41 hours and is extensively metabolized to 2-oxoquazepam, which is in turn metabolized to desalkylflurazepam having a half-life of 47 to 100 hours.

Maternal Levels. Four women received a single dose of quazepam 15 mg orally. Milk was collected at intervals up to 48 hours after the dose. Quazepam reached a maximum milk level averaging 95.8 mcg/L (range 26 to 216 mcg/L) at 3 hours (range 2 to 4 hours) after the dose. The 2-oxoquazepam metabolite reached a maximum milk level averaging 26.1 mcg/L at 3 hours (range 2 to 4 hours) after the dose. Desalkylflurazepam reached a maximum milk level averaging 2 mcg/L at 7 hours (range 4 to 12 hours) after the dose. Over the 48 hours after the dose, about 0.11% of the mother's total dose was excreted into breastmilk. The authors estimated that this amounts to 2.3% of the maternal weight-adjusted dosage. Because of accumulation with repeated administration, an exclusively breastfed infant would receive 0.19% of the mother's absolute dose or about 4% of the maternal weight-adjusted dosage.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Hilbert JM, Gural RP, Symchowicz S, Zampaglione N. Excretion of quazepam into human breast milk. J Clin Pharmacol 1984;24:457-62.6150944

## Substance Identification

### Substance Name

Quazepam

### CAS Registry Number

36735-22-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines